# Vadadustat

CASRN: 1000025-07-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of vadadustat during breastfeeding. Because vadadustat is more than 99.5% bound to plasma proteins, the amount in milk is likely to be low. However, the manufacturer recommends not breastfeeding during treatment with vadadustat, and for 2 days after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Vadadustat

### CAS Registry Number

1000025-07-9

### Drug Class

Breast Feeding

Lactation

Milk, Human